# Fludeoxyglucose F18

CASRN: 63503-12-8

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of fludeoxyglucose F18 (fluorodeoxyglucose F18; 18F-FDG) as a diagnostic agent. The use of 18F FDG in positron emission tomography (PET) scans may be preferable to other types of scans during breastfeeding because of the low levels and rapid disappearance of radiation.[1]

The amounts of 18F-FDG excreted in breastmilk after a PET scan are below the level of concern for the breastfed infant and most international radiation safety organizations state that no interruption of breastfeeding is necessary.[2-6] However, to follow the principle of keeping exposure "as low as reasonably achievable", some guidelines recommend withholding breastfeeding for 1 to 4 hours,[7,8] and product labeling recommends that mothers pump and discard breastmilk and avoid close (breast) contact with the infant for at least 9 hours after the administration of fludeoxyglucose F 18 Injection. Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[9]

Lactation can result in excessive uptake of 18F FDG in the breast.[10] Some authors recommend avoiding 18F FDG imaging of the breasts in women who are lactating to avoid false-positive results.[11] Because of extensive uptake by lactating breasts and the consequent external radiation, nursing mothers should refrain from prolonged close contact with their infants for a period of time.[1,11-13] Some authors suggest that the infant be bottle fed with expressed breastmilk by a third person for 1 feeding or 4 to 12 hours, depending on the dose, after a PET scan with 18F-FDG in a nursing mother.[1,2,12,14]

Nursing mothers should not work with radioactive substances used in PET scans in their workplace.[15]

### Drug Levels

F18 is a positron emitter with a principal decay energy of 0.6335 MeV, annihilation photons of 0.511 MeV, and a physical half-life of 1.8 hours and 0.07% of an administered dose appears in breastmilk.[4] The maximum effective half-life is 0.89 hours.[8]

Maternal Levels. Four women provided milk samples after being given 18F-FDG for a PET scan. Doses ranged from 50 to 160 MBq. Three gave a single milk sample and one gave 4 samples between 0.75 and 3.5 hours after the dose. The authors calculated that the maximum radioactivity in milk would be 19 Bq/mL for each MBq administered and that peak activity in breastmilk would occur 3 hours after administration.[1] Many diagnostic studies are performed using doses up to 370 MBq, which may require a longer period of breastfeeding abstinence.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hicks RJ, Binns D, Stabin MG. Pattern of uptake and excretion of 18F-FDG in the lactating breast. J Nucl Med 2001;42:1238-42 11483686
2 Jamar F, Buscombe J, Chiti A, et al. EANM/SNMMI guideline for 18F-FDG use in inflammation and infection. J Nucl Med 2013;54:647-58 23359660
3 Dorbala S, Di Carli MF, Delbeke D, et al. SNMMI/ASNC/SCCT guideline for cardiac SPECT/CT and PET/CT 1.0. J Nucl Med 2013;54:1485-507 23781013
4 Leide-Svegborn S, Ahlgren L, Johansson L, et al. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21 26732471
5 Mattsson S, Leide-Svegborn S, Andersson M. X-ray and molecular imaging during pregnancy and breastfeeding-when should we be worried? Radiat Prot Dosimetry 2021;195:339-48 33855370
6 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019.https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
7 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
8 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
9 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73 10809203
10 Alabed YZ, Ansari HA. 18F-fluorocholine uptake in unilateral breast related to breastfeeding in patient with primary hyperparathyroidism. Clin Nucl Med 2026;51:e61-e2 40065460
11 Hendler D, Stemmer SM. Uncommon reason for high fluorodeoxyglucose positron emission tomography uptake. J Clin Oncol 2010;28:e659-60 20713861
12 Leide-Svegborn S. Radiation exposure of patients and personnel from a PET/CT procedure with 18F-FDG. Radiat Prot Dosimetry 2010;139:208-13 20167792
13 Devine CE, Mawlawi O. Radiation safety with positron emission tomography and computed tomography. Semin Ultrasound CT MR 2010;31:39-45 20102694
14 Boellaard R, Delgado-Bolton R, Oyen WJ, et al. FDG PET/CT: EANM procedure guidelines for tumour imaging: version 2.0. Eur J Nucl Med Mol Imaging 2015;42:328-54 25452219
15 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7 28882410

## Substance Identification

### Substance Name

Fludeoxyglucose F18

### CAS Registry Number

63503-12-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Diagnostic Agents